# Coagulation Factor X

CASRN: 9001-29-0

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of coagulation factor Xa during breastfeeding. Because it is a large protein molecule with a molecular weight of about 40,000, the amount in milk is likely to be very low and absorption is unlikely because it is probably destroyed in the infant's gastrointestinal tract.[1] Until more data become available, coagulation factor X should be used with caution during breastfeeding, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Stratigakis A, Paty D, Zou P, et al. A regression approach for assessing large molecular drug concentration in breast milk. Reprod Breed 2023;3:199–207. doi:10.1016/j.repbre.2023.10.003

## Substance Identification

### Substance Name

Coagulation Factor X

### CAS Registry Number

9001-29-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Blood Coagulation Factors

Coagulants